# Ursodiol

CASRN: 128-13-2

## Drug Levels and Effects

### Summary of Use during Lactation

Ursodiol (ursodeoxycholic acid) is naturally present in human milk. Because of the low levels of ursodiol in breastmilk after exogenous administration, amounts ingested by the infant are small and are not expected to cause any adverse effects in breastfed infants.[1,2] Ursodiol has been given safely directly to newborns treat neonatal jaundice.[3,4] No special precautions are required.

### Drug Levels

Maternal Levels. A woman received oral ursodiol 750 mg daily throughout pregnancy for primary biliary cirrhosis. She continued ursodiol postpartum and ursodiol was undetectable in her breastmilk by HPLC assay. Details of milk collection and assay limits were not reported.[5]

Seven mothers with intrahepatic cholestasis of pregnancy were given oral ursodiol 14 mg/kg daily beginning an average of 14 days prior to delivery and continuing postpartum. Colostrum samples taken in the first 72 hours postpartum contained an average of 118 mcg/L. The mothers treated with ursodiol had levels of bile acids in colostrum that were much less elevated than 9 untreated control women with cholestasis of pregnancy.[6]

A woman with primary biliary cirrhosis developed severe pruritus and elevated serum bile acids 3 weeks postpartum. Ursodiol was started at a dose of 500 mg (7.5 mg/kg) daily and increased to 1500 mg (25 mg/kg) daily over the next 8 weeks. Total bile acids in breastmilk increased from 0.5 micromole/L to 1 micromole/L after 8 weeks of therapy; after 16 weeks, total bile acids in milk were 0.6 micromole/L. Ursodiol milk levels were undetectable before drug initiation, 63 mcg/L at an ursodiol dose of 500 mg daily after 2 weeks, 118 mcg/L with a dose of 1 gram daily after 4 weeks, 79 mcg/L with a dose of 1.5 grams daily after 11 weeks, and 196 mcg/L with a dose of 1.5 grams daily after 19 weeks.[7] This patient was included in the following study: Twenty patients were taking ursodiol for cholestasis in daily dosages of 500 to 1500 mg or 13 to 15 mg/kg, depending on the condition. Milk samples were obtained on day 3 postpartum from the patients as well as 4 normal volunteers who were not taking ursodiol. No difference in the total bile acid concentration in breastmilk was found between the two groups of patients (3.2 micromolar), although the proportion of ursodiol was higher in the milk of mothers taking the drug (1.5 vs 21.5%). The authors estimated that a breastfed neonate would have a daily intake of 27 mcg of ursodiol, which would represent 0.0005% of the total newborn bile acid pool.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One breastfed (extent not stated) infant developed normally over the first 6 months of life during maternal ursodiol therapy of 750 to 1000 mg daily.[5]

Seven women who were taking ursodiol 14 mg/kg daily near term and postpartum. They reported no adverse reactions in their breastfed infants during the early postpartum period.[6]

A mother receiving oral ursodiol 250 mg 3 times daily for primary biliary cirrhosis reportedly breastfed her infant normally, although the extent and duration of breastfeeding was not stated.[8]

A woman with primary biliary cirrhosis developed severe pruritus and elevated serum bile acids 3 weeks postpartum. Ursodiol was started at a dose of 500 mg (7.5 mg/kg) daily, increasing to 1500 mg (25 mg/kg) daily over the next 8 weeks. Psychomotor development of her breastfed (extent not stated) infant was normal, and no apparent side effects were observed in the infant.[7]

A retrospective review of the medical records of pregnant patients at a hospital in Ankara, Türkiye who had a diagnosis of primary biliary cirrhosis found 8 patients who took ursodiol postpartum in doses of 13–15 mg/kg daily. “Most” of the patients breastfed their infants (extent not stated). No infant side effects were reported.[9]

A woman was breastfeeding her 8-day-old preterm infant 10 times daily for about 15 minutes each time. The infant was born by cesarean section at 34 weeks of gestation with a weight of 3600 grams. She was diagnosed with cholestasis, type 1 diabetes, and hypothyroidism. She was treated with ursodiol 500 mg daily, insulin levemir and aspart, and levothyroxine. She was also taking cefuroxime, flurbiprofen, a combination of acetaminophen, propyphenazone, and caffeine. The mother took the ursodiol for a total of 12 days, cefuroxime and the analgesic combination for 10 days and flurbiprofen for 15 days. No adverse effects were noticed during the period of ursodiol treatment.[10]

Twenty nursing mothers were taking ursodiol for cholestasis in daily dosages of 500 to 1500 mg or 13 to 15 mg/kg, depending on the condition. Ursodiol was discontinued 3 days postpartum. No apparent side effects were observed in any newborn infant based on standard clinical examination during early postnatal period, and no deterioration in postnatal development was observed during routine 1-year follow-up on routine pediatric examinations.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 de Vries E, Beuers U. Ursodeoxycholic acid in pregnancy? J Hepatol 2019;71:1237-45 31479696
2 Šimják P, Petr T, Kaslová B, et al. Ursodeoxycholic acid use in lactating female patients is associated with clinically negligible concentrations of this bile acid in breast milk. Sci Rep 2022;12:19543 36379995
3 Ozdemir A, Kurtoglu S, Halis H, et al. An evaluation of ursodeoxycholic acid treatment in prolonged unconjugated hyperbilirubinemia due to breast milk. Niger J Clin Pract 2023;26:1226-33 37794533
4 Vivek C, Gidaganti SM, Gobbur RH, et al. Effect of ursodeoxycholic acid on unconjugated hyperbilirubinemia in the term neonates treated with phototherapy: A prospective interventional study. J Clin Diagn Res 2025;19:SC01-SC3. doi:10.7860/JCDR/2025/80533.22074
5 Rudi J, Schonig T, Stremmel W. Therapy with ursodeoxycholic acid in primary biliary cirrhosis in pregnancy. Z Gastroenterol 1996;34:188-91 8650973
6 Brites D, Rodrigues CM. Elevated levels of bile acids in colostrum of patients with cholestasis of pregnancy are decreased following ursodeoxycholic acid therapy. J Hepatol 1998;29:743-51 9833912
7 Vítek L, Zelenkova M, Bruha R. Safe use of ursodeoxycholic acid in a breast-feeding patient with primary biliary cirrhosis. Dig Liver Dis 2010;42:911-2 20619755
8 Goh SK, Gull SE, Alexander GJ. Pregnancy in primary biliary cirrhosis complicated by portal hypertension: Report of a case and review of the literature. BJOG 2001;108:760-2 11467706
9 Efe C, Kahramanoglu-Aksoy E, Yilmaz B, et al. Pregnancy in women with primary biliary cirrhosis. Autoimmun Rev 2014;13:931-5 24879082
10 Erol-Coskun H, Karagur N, Akyol F, et al. Ursodiol use during breastfeeding: A case report. Reprod Toxicol 2018;80:59. doi:10.1016/j.reprotox.2018.07.070

## Substance Identification

### Substance Name

Ursodiol

### CAS Registry Number

128-13-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bile Acids and Salts

Cholagogues and Choleretics

Cholic Acids

Gastrointestinal Agents